# Icatibant

CASRN: 130308-48-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the excretion of icatibant into breastmilk. Because icatibant is a protein molecule with a molecular weight of 1305 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. One patient reportedly used the drug safely during breastfeeding. Waiting 6-12 hours after a dose before breastfeeding should minimize the amount of drug excreted into breastmilk.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with hereditary angioedema began using icatibant 30 mg subcutaneously as needed for hereditary angioedema attacks when her breastfed infant was 4 months of age and continued breastfeeding for 1 year while taking icatibant. Doses were injected at night before the infant’s longest sleep period and breastfeeding was not resumed until at least 6 hours after a dose. In cases of swelling of the face and neck and abdominal pain, icatibant was immediately self-administered, and formula was given instead of breastmilk. In her second pregnancy 2 years later, she used C1 esterase inhibitor until the infant was 1 month of age, when she resumed icatibant therapy.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

C1 Esterase Inhibitor

### References

1 Betschel S, Binkley K, Borici-Mazi R, et al. The International/Canadian hereditary angioedema guideline. Allergy Asthma Clin Immunol 2026 41606636
2 Kondo Y, Yoshimura A, Azuma N. Successful management of hereditary angioedema with icatibant during the postpartum period. Journal of Cutaneous Immunology and Allergy 2023;6:26-7. doi:10.1002/cia2.12267

## Substance Identification

### Substance Name

Icatibant

### CAS Registry Number

130308-48-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bradykinin Receptor Antagonists

Bradykinin B2 Receptor Antagonists